# Benzthiazide

CASRN: 91-33-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the amount of benzthiazide in breastmilk. Intense diuresis with large doses may decrease breastmilk production. Other diuretics in low doses are preferred over benzthiazide.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information on benzthiazide was not found as of the revision date. Intense diuresis with thiazides and thiazide-like diuretics, fluid restriction and breast binding have been used to suppress postpartum lactation.[1-4] The added contribution of the diuretic to these measures, which are effective in suppressing lactation, has not been studied. There are no data on the effects of diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;1:1353-4.4134342
2 Stout G. Suppression of lactation. Br Med J 1962;1:1150.18117911
3 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90.13973786
4 Cominos DC, Van Der Walt A, Van Rooyen AJ. Suppression of postpartum lactation with furosemide. S Afr Med J 1976;50:251-2.3858

## Substance Identification

### Substance Name

Benzthiazide

### CAS Registry Number

91-33-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics